# St. John's Wort

CASRN: 68917-49-7

## Drug Levels and Effects

### Summary of Use during Lactation

St. John's wort (Hypericum perforatum) contains hypericin and hyperforin as well as flavonoids such as quercetin. It is often recommended by midwives for postpartum depression.[1,2] Both hypericin and hyperforin are poorly excreted into breastmilk; no other components have been measured in milk. One study found a slightly increased frequency of colic, drowsiness and lethargy among breastfed infants whose mothers were taking St. John's wort, but none of the effects were severe or required treatment. Most reports have related to breastfeeding older infants, rather than during the first 2 months postpartum when infants are more susceptible to adverse reactions. Conflicting information exists on whether St. John's wort can reduce serum prolactin levels or the maternal milk supply, although some mothers in Türkiye reportedly use it to increase their milk supply.[3] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[4,5] St. John's wort adversely interacts with many drugs by increasing their metabolism, and it can occasionally cause phototoxicity. Labeling of commercially available products in the United States is often deficient with respect to these known safety issues.[6] Because there is little published experience with St. John's wort during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.[6]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Most studies have used Jarsin brand (Lichtwer Pharma AG, Berlin, Germany, marketed as Kira brand in the United States) of St. John's wort which is an 80% methanolic dry extract that contains 0.21% hypericin and 2.5% hyperforin.[7]

Maternal Levels. Hypericin and Hyperforin A postpartum woman with depression began taking St. John's wort (Jarsin brand) 300 mg 3 times daily starting at 5 months postpartum. At 7 months postpartum, 8 breastmilk samples (4 foremilk and 4 hindmilk) were taken over an 18-hour period. Hypericin was undetectable (<0.2 mcg/L) in all samples. In foremilk, hyperforin was undetectable (<0.5 mcg/L) in 2 samples and was 0.58 and 1.01 mcg/L in 2 others. In hindmilk, hyperforin was found in all samples with an average concentration of 5.77 mcg/L. The lowest level of 0.86 mcg/L was at about 2.25 hours after the morning dose, and the highest level of 18.2 mcg/L was about 1.75 hours before the morning dose and 10 hours after the previous nursing.[8]

In a second study by the same group, 5 women who were 10 to 22 weeks postpartum and had been taking St. John's wort (Jarsin brand) 300 mg 3 times daily for at least 4 weeks provided milk samples over an 18-hour period. From a total of 36 fore- and hindmilk samples, the overall average hyperforin concentrations in foremilk and hindmilk were both 3.5 mcg/L (range 0.1 to 31.5 mcg/L). Hypericin was not measured. The average infant dosage was 1.5% (range 0.9 to 2.5%) of the maternal weight-adjusted dosage.[9]

Quercetin has not been measured in milk after its ingestion, but it has been measured after the ingestion of other foods.[10] Milk samples from 17 nursing mothers on uncontrolled diets were taken at 1, 4 and 13 weeks postpartum at times between 10 am and 1 pm. Average quercetin levels in breastmilk were 48 nmol/L at week 1, 60 nmol/L at week 4 and 51 nmol/L at week 13. Because of the uncontrolled diet and varying sampling times, the range of values among individuals was large.[11]

Quercetin was measured in the milk of 11 mothers after they received an onion soup that contained either 0.8 or 1 mg/kg of quercetin glucosides. A baseline milk sample was obtained after a 5-day low-quercetin diet, and 7 milk samples were obtained over the 48 hours following soup ingestion. Baseline total (from conjugated and unconjugated) quercetin in breastmilk averaged 45 nmol/L. An average peak milk quercetin level of 68 nmol/L was attained at an average of 11.9 hours after the soup meal. The average half-life of quercetin in breastmilk was 50.3 hours.[12]

Infant Levels. Hypericin and Hyperforin A postpartum woman with depression began taking St. John's wort (Jarsin brand) 300 mg 3 times daily starting at 5 months postpartum. At 7 months postpartum, her breastfed (extent not stated) infant had a blood sample taken 8 hours after a dose. Neither hypericin (<0.2 mcg/L) nor hyperforin (<0.5 mcg/L) were detectable in the infant's plasma.[8]

Two infants were exclusively breastfed by mothers who had been taking St. John's wort (Jarsin brand) 300 mg 3 times daily for at least 4 weeks. Infant blood samples were taken when the infants were 10 and 22 weeks old, respectively. Both of their plasma hyperforin concentrations were at the limit of detection of 0.1 mcg/L.[9]

### Effects in Breastfed Infants

A woman took St. John's wort 300 mg daily (product details not specified) during pregnancy, discontinued it at term and then reinstituted it at 20 days postpartum. Her breastfed (extent not stated) infant was found to have a normal behavioral assessment on days 4 and 33.[13]

A postpartum woman with depression began taking St. John's wort (Jarsin brand) 300 mg 3 times daily starting at 5 months postpartum. At 7 months postpartum, no side effects were noted in her breastfed (extent not stated) infant and the infant's developmental score was normal.[8]

A matched cohort study compared 33 women who reported that they had taken St. John's wort during breastfeeding to 2 control groups who were either disease matched (primarily depression), or age and parity matched. The duration of breastfeeding was similar across all groups and ranged from a mean of 10.8 to 12.1 months. Formula was introduced on average between 4.3 and 6.3 months, with no statistical differences between groups. The brands of St. John's wort used were not reported. The average daily dosage was 705 mg (range 225 to 2150 mg daily), and the average duration of therapy was 1.5 months, beginning at 4.2 months (range 0 to 11 months) postpartum. The average duration of St. John's wort exposure in the infants via breastmilk was 2.1 months. Mothers who were taking St. John's wort more frequently reported infant colic (n = 2), drowsiness (n = 2) and lethargy (n = 1) than mothers in the other groups in which only 1 case of colic was reported in each group. The difference was statistically significant between the treatment and disease-matched control groups. Between these 2 groups, there were no differences in the proportion of women taking conventional antidepressants overall or among mothers of affected infants, or in the dosages the mothers took. None of the affected infants required specific medical treatment and there was no difference in weight gain between subsets of the groups in whom weight could be obtained between 15 and 16 months of age.[14]

Five women who were 10 to 22 weeks postpartum had been taking St. John's wort (Jarsin brand) 300 mg 3 times daily for at least 4 weeks and exclusively breastfeeding their infants. Mothers were asked if they had noticed any gastrointestinal symptoms, lethargy, rashes, photosensitivity, or changes in sleep pattern. None of the mothers observed any adverse effects or unusual behavior in their infants, and the infants grew normally during maternal therapy.[9]

### Effects on Lactation and Breastmilk

In a matched cohort study of 33 women who reported that they had taken St. John's wort during breastfeeding, no evidence was found of lower milk production among mothers taking St. John's wort during breastfeeding.[14]

Thirty-six women with mild premenstrual syndrome received St. John's wort 450 mg twice daily as coated tablets (Jarsin brand) or placebo for two menstrual cycles. Serum prolactin levels of the women randomized to active treatment (n = 19) were not statistically different from those of the women who received placebo (n = 17) in either the follicular or luteal phase of their menstrual cycles.[15]

Studies in healthy volunteer males (n = 12) given single doses of 2700 mg of St. John's wort (Jarsin brand) had a drop in serum prolactin that was statistically significant between 150 and 210 minutes after administration.[16]

The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Allaire AD, Moos MK, Wells SR. Complementary and alternative medicine in pregnancy: A survey of North Carolina certified nurse-midwives. Obstet Gynecol 2000;95:19-23.10636495
2 Dennehy C, Tsourounis C, Bui L, et al. The use of herbs by California midwives. J Obstet Gynecol Neonatal Nurs 2010;39:684-93.21044150
3 Kaygusuz M, Gümüştakım RŞ, Kuş C, et al. TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
4 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
5 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
6 Clauson KA, Santamarina ML, Rutledge JC. Clinically relevant safety issues associated with St. John's wort product labels. BMC Complement Altern Med 2008;8:42.18637192
7 Wurglics M, Westerhoff K, Kaunzinger A, et al. Comparison of German St. John's wort products according to hyperforin and total hypericin content. J Am Pharm Assoc (Wash) 2001;41:560-6.11486982
8 Klier CM, Schafer MR, Schmid-Siegel B, et al. St. John's wort (Hypericum perforatum) -- is it safe during breastfeeding? Pharmacopsychiatry 2002;35:29-30.11819157
9 Klier CM, Schmid-Siegel B, Schafer MR, et al. St. John's wort (Hypericum perforatum) and breastfeeding: plasma and breast milk concentrations of hyperforin for 5 mothers and 2 infants. J Clin Psychiatry 2006;67:305-9.16566628
10 Williamson G, Clifford MN. A critical examination of human data for the biological activity of quercetin and its phase-2 conjugates. Crit Rev Food Sci Nutr 2025;65:1669-705.38189312
11 Song BJ, Jouni ZE, Ferruzzi MG. Assessment of phytochemical content in human milk during different stages of lactation. Nutrition 2013;29:195-202.23237648
12 Romaszko E, Wiczkowski W, Romaszko J, et al. Exposure of breastfed infants to quercetin after consumption of a single meal rich in quercetin by their mothers. Mol Nutr Food Res 2014;58:221-8.23963751
13 Grush LR, Nierenberg A, Keefe B, et al. St John's wort during pregnancy. JAMA 1998;280:1566.9820253
14 Lee A, Minhas R, Matsuda N, et al. The safety of St. John's wort (Hypericum perforatum) during breastfeeding. J Clin Psychiatry 2003;64:966-8.12927015
15 Canning S, Waterman M, Orsi N, et al. The efficacy of Hypericum perforatum (St John's wort) for the treatment of premenstrual syndrome: A randomized, double-blind, placebo-controlled trial. CNS Drugs 2010;24:207-25.20155996
16 Franklin M, Cowen PJ. Researching the antidepressant actions of Hypericum perforatum (St. John's wort) in animals and man. Pharmacopsychiatry 2001;34 (Suppl 1):S29-37.11518072

## Substance Identification

### Substance Name

St. John's Wort

### Scientific Name

Hypericum perforatum

### CAS Registry Number

68917-49-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Anxiety Agents

Antidepressive Agents

Complementary Therapies

Phytotherapy

Plants, Medicinal